# Rimexolone

CASRN: 49697-38-3

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the ophthalmic use of rimexolone during breastfeeding. Because absorption from the eye is limited, ophthalmic rimexolone would not be expected to cause any adverse effects in breastfed infants. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Prednisolone

## Substance Identification

### Substance Name

Rimexolone

### CAS Registry Number

49697-38-3

### Drug Class

- Breast Feeding
- Lactation
- Anti-Inflammatory Agents
- Corticosteroids, Ophthalmic
- Glucocorticoids